# Fondaparinux

CASRN: 114870-03-0

## Drug Levels and Effects

### Summary of Use during Lactation

Fondaparinux is considered to be acceptable to use during breastfeeding.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acenocoumarol, Dalteparin, Enoxaparin, Heparin, Rivaroxaban, Warfarin

### References

1 Bates SM, Rajasekhar A, Middeldorp S, et al. (2018). American Society of Hematology 2018 guidelines for management of venous thromboembolism: Venous thromboembolism in the context of pregnancy. Blood Adv.

## Substance Identification

### Substance Name

Fondaparinux

### CAS Registry Number

114870-03-0

### Drug Class

Breast Feeding

Lactation

Anticoagulants